# Ioversol

CASRN: 87771-40-2

## Drug Levels and Effects

### Summary of Use during Lactation

Intravenous iodinated contrast media are poorly excreted into breastmilk and poorly absorbed orally so they are not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants. Guidelines developed by several professional organizations state that breastfeeding need not be disrupted after a nursing mother receives an iodine-containing contrast medium.[1-4] However, because there is no published experience with ioversol during breastfeeding, other agents may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Diatrizoate, Iohexol

### References

1 Webb JA, Thomsen HS, Morcos SK, et al. (2005). The use of iodinated and gadolinium contrast media during pregnancy and lactation. Eur Radiol.
2 Chen MM, Coakley FV, Kaimal A, et al. (2008). Guidelines for computed tomography and magnetic resonance imaging use during pregnancy and lactation. Obstet Gynecol.
3 Copel J, El-Sayed Y, Heine RP, et al. (2017). Committee Opinion No. 723: Guidelines for diagnostic imaging during pregnancy and lactation. Obstet Gynecol.
4 American College of Radiology Committee on Drugs and Contrast Media. Administration of contrast media to breast-feeding mothers. In, ACR manual on contrast media. 2022;Version 2022:106-7. https://www.acr.org/Clinical-Resources/Contrast-Manual

## Substance Identification

### Substance Name

Ioversol

### CAS Registry Number

87771-40-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contrast Media

Diagnostic Agents